# Digoxin Immune Fab

CASRN: 497227-50-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of digoxin immune fab (ovine) during breastfeeding. Because it is a large protein molecule with a molecular weight of about 46,000 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably partially destroyed in the infant's gastrointestinal tract and poorly absorbed by the infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Digoxin Immune Fab

### CAS Registry Number

497227-50-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Antidotes

Immunoglobulin Fragments